# Quetiapine

CASRN: 111974-69-7

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal quetiapine doses of up to 400 mg daily produce doses in milk that are less than 1% of the maternal weight-adjusted dosage. Limited long-term follow-up of infants exposed to quetiapine indicates that infants generally developed normally. A safety scoring system finds quetiapine to be possible to use during breastfeeding.[1] Systematic reviews of second-generation antipsychotics concluded that quetiapine seemed to be the first- or second-choice agent during breastfeeding.[2-4] Monitor the infant for drowsiness and developmental milestones, especially if other antipsychotics are used concurrently. Cases of galactorrhea and milk ejection in non-nursing women have been reported rarely.

### Drug Levels

Maternal Levels. One mother took oral quetiapine 200 mg daily throughout pregnancy and postpartum. At 3 weeks postpartum, milk samples were taken. The average milk level over the 6-hour dosage interval was 13 mcg/L. A peak milk quetiapine level of 62 mcg/L occurred at 1 hour after the dose. The authors estimated that an exclusively breastfed infant would receive 0.09% of the weight-adjusted maternal dosage on average, with a "worst-case" dosage (assuming all nursing was at the peak concentration) of 0.43% of weight-adjusted maternal dosage.[5]

Six nursing mothers who were 6.5 to 18.5 weeks postpartum were taking quetiapine in doses of 25 to 400 mg daily in addition to an antidepressant for major depression postpartum. Milk samples obtained at various times after the dose had undetectable (<11.5 mcg/L) levels of quetiapine in the 4 mothers taking 75 mg daily or less. A mother taking 100 mg daily had a milk quetiapine level of 12.3 mcg/L and another taking 400 mg daily had a level of 101 mcg/L. The authors estimated that exclusively breastfed infants would receive less than 0.01 mg/kg daily with maternal doses of 100 mg daily or less and less than 0.1 mg/kg daily with a maternal dose of 400 mg daily.[6]

A woman who was 3 months postpartum and taking quetiapine 400 mg daily, fluoxetine 40 mg daily, and oxycodone 20 mg 3 times daily had 16 milk samples taken over 24 hours starting immediately before a daily dose of quetiapine; 12 were paired fore- and hindmilk and the other 4 samples were mixtures of fore- and hindmilk. The highest quetiapine level measured in milk of about 170 mcg/L occurred within 1 hour after the dose. Milk levels dropped to nearly zero by 12 hours after the dose. No differences were noted between fore- and hindmilk concentrations. The authors estimated that the infant received 6.2 mcg/kg daily and that a fully breastfed infant would receive 0.09% of the maternal weight-adjusted dosage.[7]

A nursing mother was taking quetiapine in a dosage of 200 mg daily. Quetiapine was undetectable (<5 mcg/L) in her breastmilk.[8]

In a study of 9 women taking quetiapine in an average dose of 37 mg daily (range 6.25 - 100 mg daily), simulations of infant exposure indicated that the infant would receive <0.5% of the maternal weight-adjusted dosage.[9] Further population analysis of the data was performed using NONMEM. Using the data obtained, 1000 computer simulations of breastmilk concentrations and infant dosages were performed. Results showed that 99% of breastfed infants would ingest quetiapine in dosages below 0.42% of the maternal weight-adjusted dose.[10]

One woman was taking quetiapine 200 mg daily at 11 pm. She avoided breastfeeding from 11 pm to 7 am each day. Breastmilk samples were collected at 4 am, 8 am and 11 pm daily for 26 days. The average quetiapine concentrations in her breastmilk were 11.7 mcg/L, at 4 am, 5.4 mcg/L at 8 am, and 0.9 mcg/L at 11 pm. The authors estimated that her infant would receive a maximum of 0.37 mg/kg daily and a median dosage of 0.1 mg/kg daily, which would translate to 0.017% and 0.005% of the weight-adjusted maternal dosage, respectively.[11]

A woman with bipolar disorder who delivered twins and was taking sodium valproate was started on quetiapine 200 mg and olanzapine 15 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. After 7 days of therapy, milk samples were obtained at 4 am, 8 am and 11 pm for 27 of the next 45 days. The median average daily quetiapine milk concentration was 3.7 mcg/L. Median milk concentrations were 10.7 mcg/L at 4 am, 3.7 mg/L at 8 am and 0.9 mg/L at 11 pm. The authors calculated that if the infants had been fully breastfed, they would have received a daily dosage of 0.38 mcg/kg or 0.02% of the maternal weight-adjusted dosage. By withholding nursing during the night, the infants' quetiapine dosage was reduced by 55% compared to the dose they would have received if they had been breastfed around the clock.[12]

Nine breastfeeding mothers who were taking rapid-release quetiapine in an average dose of 41 mg daily provided milk samples at approximately 0, 1, 2, 4, 7, 12, and 24 hours after a dose. The peak milk concentration of quetiapine occurred at 2 hours after the dose and declined with a half-life of 7.4 hours. The average milk concentration was 5.7 mcg/L (range 1.4 to 13.9 mcg/L). The authors estimated the mean infant quetiapine dose was 0.16% of the maternal weight-adjusted dosage.[13]

A woman was taking oral extended-release quetiapine 300 mg daily during the last 3 months of pregnancy and postpartum. She breastfed her infant and provided a milk sample on two occasions. At one month postpartum, her serum quetiapine level at 17 hours after a dose was subtherapeutic and quetiapine was not detectable in milk. The low levels were thought to be a result of poor compliance with the dosage regimen. At 3 months postpartum, the serum level was in the therapeutic range at 11 hours after a dose and a milk level at the same time was 30 mcg/L, corresponding to a relative infant dosage of 0.09%.[14]

A woman with schizophrenia received brexpiprazole 2 mg once daily, risperidone 2 mg twice daily and quetiapine 12.5 mg twice daily during pregnancy and postpartum. The concentration of quetiapine in milk was below 0.27 mcg/L on day 4 approximately 2 hours after the last dose, on day 5 at 6.5 hours after the last dose, and on day 6 at 22 hours after the last dose.[15]

Infant Levels. A 3-month-old infant who was breastfed 6 to 7 times daily during maternal use of 400 mg daily of quetiapine had a plasma quetiapine level of 1.4 mcg/L. This level was 6% of the mother's quetiapine plasma level at the same time.[7]

In a study of 9 women taking quetiapine in an average dose of 37 mg daily (range 6.25 - 100 mg daily), simulations of infant exposure indicated that the infant would be expected to attain serum concentrations <0.6% of the maternal serum quetiapine concentration.[9]

A woman was taking quetiapine 100 mg each night for treatment of bipolar disorder during 2 pregnancies. and during breastfeeding. She breastfed both preterm infants and on 2 days, milk was pumped 1 hour after the dose, at the presumed time of the peak milk quetiapine level and given to the infant. Infant serum levels were measured one hour after the breastmilk intake on 2 separate occasions. In one infant, serum quetiapine levels were <1 and 3 mcg/L on days 6 and 33 of age, respectively. In the second infant, serum quetiapine levels were 0 (<0.096 mcg/L) and 15 mcg/L on days 4 and 6 of age, respectively.[16]

A breastfed newborn infant whose mother was taking brexpiprazole 2 mg once daily, risperidone 2 mg twice daily and quetiapine 12.5 mg twice daily during pregnancy and postpartum had serum levels measured. At birth, the cord blood level was 0.36 mcg/L from maternal use during pregnancy. The neonate ingested small volumes of colostrum and milk 12 times from 46 to 86.5 hours after birth. By 16.5 hours postpartum, the infant’s serum quetiapine concentration was undetectable (< 0.25 mcg/L) and it remain undetectable up to 137 hours postpartum when sampling was discontinued.[15]

### Effects in Breastfed Infants

One mother took quetiapine 25 mg daily orally during pregnancy and continued to take quetiapine 50 mg daily orally during lactation. At 6 weeks the infant was doing well. No further follow-up was reported.[17]

Another infant whose mother was taking 200 mg daily of quetiapine began to exclusively breastfeed at 8 weeks of age. The infant was developing well at 4.5 months of age and no adverse effects were reported.[5]

A nursing mother with postpartum psychosis was started on quetiapine at 6 weeks postpartum at a dose of 25 mg daily along with unspecified benzodiazepines. The quetiapine dosage was increased gradually to 200 mg daily over the next 6 weeks and up to 300 mg daily over the ensuing 4 weeks (16 weeks postpartum). Mirtazapine 15 mg daily was also started at 8 weeks postpartum. Breastfeeding (extent not specified) was continued until 16 weeks postpartum when it was stopped because of reduced milk production. During this time, the infant was excessively drowsy until the benzodiazepine dosage was decreased at the same time as the quetiapine dosage was increased. The infant was followed for at least 2 months after breastfeeding ended and no effects on the infant's growth, motor or psychological development or signs of infant withdrawal were noted.[18]

A nursing mother with bipolar disorder began taking 20 mg of paroxetine at 4 months postpartum and then started quetiapine 200 mg twice daily at 6 months postpartum. She breastfed regularly (extent not stated) and no obvious adverse effects were noted in the infant.[19]

A woman who was treated chronically with quetiapine 400 mg and fluvoxamine 200 mg daily took the drugs throughout pregnancy and postpartum. She partially breastfed her infant (extent not stated) for 3 months from birth. No adverse events were seen and the infant developed normally.[20]

Six nursing mothers took quetiapine in doses of 25 to 400 mg daily in addition to an antidepressant (usually paroxetine) for major depression postpartum. Their breastfed infants' development were tested at 9 to 18 months of age with the Bayley scales. Measurements were slightly low on the mental and psychomotor development scale in one infant and on the mental development scale in another. All other scores were within normal limits. The authors concluded that the low scores of the 2 infants were probably not caused by the drugs received by the infants in breastmilk.[6]

An infant was born to a mother taking quetiapine 400 mg daily, fluoxetine 40 mg daily and oxycodone 20 mg 3 times daily. The infant was breastfed 6 to 7 times daily and was receiving 120 mcg of oral morphine 3 times daily for opiate withdrawal. Upon examination at 3 months of age, the infant's weight was at the 25th percentile for age, having been at the 50th percentile at birth. The authors attributed the weight loss to opiate withdrawal. The infant's Denver developmental score was equal to his chronological age.[7]

One 60-week-old infant who was 50% breastfed was breastfed during maternal therapy with quetiapine 75 mg daily mg daily and venlafaxine 225 mg daily. No adverse reactions were reported by the mother or in the medical records.[21]

A woman with bipolar disorder who delivered twins and was taking sodium valproate in a therapeutic dosage was started on quetiapine 200 mg and olanzapine 15 mg at 11 pm daily after 20 days postpartum. She withheld breastfeeding during the night and discarded milk pumped at 7 am. She then breastfed her infants until 11 pm. The mother continued feeding the infants on this schedule for 15 months. Monthly follow-up of the infants indicated normal growth and neither the pediatricians nor the parents noted any adverse effects in the infants.[12]

A mother taking quetiapine 100 mg each night for bipolar disorder breastfed 2 successive preterm infants. Both infants were reported to be developing normally at their last follow-up visits (exact times not specified).[16]

A woman with bipolar disorder took quetiapine 25 mg and lamotrigine 100 mg daily for the treatment of bipolar disorder during two pregnancies. After the first birth, she did not breastfeed, but she breastfed (extent not stated) the second infant. At the 2-month well baby checkup, the infant was meeting all developmental milestones.[22]

A woman received a combination of 300 mg lamotrigine and 300 of quetiapine daily for postpartum bipolar II postpartum depression. The authors reported no major adverse reactions in her breastfed (extent not stated) infant.[23]

An author reported 1 infant who was breastfed (extent not stated) during postpartum maternal treatment for bipolar disorder. Her quetiapine dosage was 200 mg daily. The mother reported no adverse effects in the infants.[24]

A prospective cohort study of infants breastfed by mothers in an inpatient mother-baby psychiatric unit in India followed 2 infants who were exposed to quetiapine in breastmilk; most received partial supplementation. Neither had any short-term adverse effects. Infants were followed for 1 to 3 months after discharge and one of the infants who was also exposed to quetiapine in utero had motor and mental delay.[25]

A woman was taking oral extended-release quetiapine 300 mg daily during the last 3 months of pregnancy and postpartum. At 3 months postpartum, her breastfed (extent not stated) infant had no apparent adverse effects and was developing normally.[14]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[26] The number of women taking quetiapine was not reported.

A woman with bipolar disorder took brexpiprazole and quetiapine during pregnancy and postpartum. The quetiapine dosage was titrated to 150 mg nightly, and the brexpiprazole dosage was 1 mg daily. The patient exclusively breastfed and her infant was closely monitored through 6 months of age. Growth parameters, physical health, and neurodevelopmental milestones were age appropriate, with no observed adverse effects attributable to medication exposure.[27]

### Effects on Lactation and Breastmilk

Unlike the phenothiazines, quetiapine has a minimal effect on serum prolactin levels.[28-30] However, galactorrhea has been reported.[31] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Galactorrhea occurred in a woman who was not breastfeeding while she was taking venlafaxine 112.5 mg daily and quetiapine. Galactorrhea occurred 10 days after her quetiapine dose was increased to 50 mg daily a few days after starting the drug at 12.5 mg daily. Her serum prolactin level was 27.3 mcg/L (normal 2 to 30 mcg/L) and decreased to 8.5 mcg/L 2 weeks after discontinuing the drug. Galactorrhea ceased 1 week later.[32]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[26] The number of women taking quetiapine was not reported.

A woman began using quetiapine 4 weeks postpartum for intrusive thoughts. She took her daily dose of 50 mg at 11 pm after the last nursing of the day. Every night she experienced a tingling sensation and milk ejection about 30 to 40 minutes after the dose over a period of 6 months. On one occasion she did not take the dose and the milk ejection did not occur. When she resumed the drug the next night, the milk ejection resumed.[33] Milk ejection was probably caused by quetiapine.

A review of the FDA’s FAERS database analyzed 6,195 reports of drug-induced galactorrhea in all patient populations. Quetiapine had the fourth-highest report count (147) of all drugs reported.[34]

### Alternate Drugs to Consider

(Antipsychotic) Haloperidol, Olanzapine, Risperidone; (Bipolar Disorder) Divalproex, Lithium, Olanzapine, Risperidone, Valproic Acid

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
2 Larsen ER, Damkier P, Pedersen LH, et al. Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1–28.26344706
3 Uguz F. Second-generation antipsychotics during the lactation period: A comparative systematic review on infant safety. J Clin Psychopharmacol 2016;36:244–52.27028982
4 Pacchiarotti I, Leon-Caballero J, Murru A, et al. Mood stabilizers and antipsychotics during breastfeeding: Focus on bipolar disorder. Eur Neuropsychopharmacol 2016;26:1562–78.27568278
5 Lee A, Giesbrecht E, Dunn E, et al. Excretion of quetiapine in breast milk. Am J Psychiatry 2004;161:1715–6.15337669
6 Misri S, Corral M, Wardrop AA, et al. Quetiapine augmentation in lactation: A series of case reports. J Clin Psychopharmacol 2006;26:508–11.16974194
7 Rampono J, Kristensen JH, Ilett KF, et al. Quetiapine and breast feeding. Ann Pharmacother 2007;41:711–4.17374621
8 Kruninger U, Meltzer V, Hiemke C, et al. Pregnancy and lactation under treatment with quetiapin. Psychiatr Prax 2007;34 (Suppl 1):S75–6. doi:10.1055/s-2006-940185
9 Yazdani-Brojeni P, Taguchi N, García-Bournissen F, et al. Quetiapine in human milk and simulation-based assessment of infant exposure. Clin Pharmacol Ther 2010;87 (Suppl. 1):S3–4. doi:10.1038/clpt.2009.268
10 Tanoshima R, Yazdani-Brojeni P, Taguchi N, et al. Quetiapine in human breast milk - population PK analysis of milk levels and simulated infant exposure. J Popul Ther Clin Pharmacol 2012;19:e267–8.
11 Var L, Ince I, Topuzoglu A, et al. Management of postpartum manic episode without cessation of breastfeeding: A longitudinal follow up of drug excretion into breast milk. Eur Neuropsychopharmacol 2013;23 (Suppl 2):S382. https://www.sciencedirect.com/journal/european-neuropsychopharmacology/vol/23/suppl/S2
12 Aydin B, Nayir T, Sahin S, et al. Olanzapine and quetiapine use during breastfeeding: Excretion into breast milk and safe breastfeeding strategy. J Clin Psychopharmacol 2015;35:206–8.25679127
13 Yazdani-Brojeni P, Tanoshima R, Taguchi N, et al. Quetiapine excretion into human breast milk. J Clin Psychopharmacol 2018;38:362–4.29912789
14 Pastol J, Le Marois M, Guilhaumou R, et al. Measuring drug concentrations in breast milk to improve therapeutic monitoring and patient adherence in bipolar disorder: A case report. Aust N Z J Psychiatry 2022;56:96.33938286
15 Konishi T, Kitahiro Y, Fujiwara N, et al. Pharmacokinetics of brexpiprazole, quetiapine, risperidone, and its active metabolite paliperidone in a postpartum woman and her baby. Ther Drug Monit 2024;46:687–91.38648649
16 Van Boekholt AA, Hartong EG, Huntjens-Fleuren H, et al. Quetiapine concentrations during exclusive breastfeeding and maternal quetiapine use. Ann Pharmacother 2015;49:743–4.25975996
17 Balke LD. Quetiapine effective in the treatment of bipolar affective disorder during pregnancy. World J Biol Psychiatry 2001;2:303S.
18 Seppala J. Quetiapine ('Seroquel') is effective and well tolerated in the treatment of psychotic depression during breast-feeding. Int J Neuropsychopharmacol 2004;7 (Suppl 2):S245. doi:10.1017/S1461145704004547
19 Ritz S. Quetiapine monotherapy in post-partum onset bipolar disorder with a mixed affective state. Eur Neuropsychopharmacol 2005;15 (Suppl 3):S407. doi:10.1016/S0924-977X(05)80825-9
20 Gentile S. Quetiapine-fluvoxamine combination during pregnancy and while breastfeeding. Arch Womens Ment Health 2006;9:158–9.16683078
21 Newport DJ, Ritchie JC, Knight BT, et al. Venlafaxine in human breast milk and nursing infant plasma: Determination of exposure. J Clin Psychiatry 2009;70:1304–10.19607765
22 Lévesque S, Riley C. Fetal exposure to lamotrigine and quetiapine in two consecutive pregnancies. Arch Womens Ment Health 2017;20:237–9.27785634
23 Sharma V, Sommerdyk C. Lamotrigine in the prevention of bipolar II postpartum depression. Prim Care Companion CNS Disord 2016;18 27907274
24 Uguz F. Prophylactic use of olanzapine and quetiapine from pregnancy to the postpartum period in women with bipolar disorder: A case series. J Matern Fetal Neonatal Med 2017;30:2569–71.27809629
25 Sinha SK, Thomas Kishore M, Thippeswamy H, et al. Adverse effects and short-term developmental outcomes of infants exposed to atypical antipsychotics during breastfeeding. Indian J Psychiatry 2021;63:52–7.34083820
26 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
27 Alsupiany A. Brexpiprazole and quetiapine use during pregnancy and lactation: A case report. Clin Case Rep 2026;14:e73092.42416040
28 Atmaca M, Kuloglu M, Tezcan E, et al. Quetiapine is not associated with increase in prolactin secretion in contrast to haloperidol. Arch Med Res 2002;33:562–5.12505103
29 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56–62.11913677
30 Arvanitis LA, Miller BG. Multiple fixed doses of "Seroquel" (quetiapine) in patients with acute exacerbation of schizophrenia: A comparison with haloperidol and placebo. The seroquel trial 13 study group. Biol Psychiatry 1997;42:233–46.9270900
31 Glocker C, Grohmann R, Engel R, et al. Galactorrhea during antipsychotic treatment: Results from AMSP, a drug surveillance program, between 1993 and 2015. Eur Arch Psychiatry Clin Neurosci 2021;271:1425–35.33768297
32 Pae CU, Kim JJ, Lee CU, et al. Very low dose quetiapine-induced galactorrhea in combination with venlafaxine. Hum Psychopharmacol 2004;19:433–4.15303249
33 Passier A, Lamers M, van den Berg K, et al. Quetiapine intake and milk ejection reflex in a breastfeeding woman: A case report. Neurotoxicol Teratol 2023;98:25. doi:10.1016/j.ntt.2023.107238
34 Liu Y, Hu D, Lu Y, et al. Global large-scale real-world assessment of drug-associated galactorrhea based on FDA adverse drug reaction reports. Pak J Pharm Sci 2026;39:1–9.41482770

## Substance Identification

### Substance Name

Quetiapine

### CAS Registry Number

111974-69-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents